# Streptomycin

CASRN: 57-92-1

## Drug Levels and Effects

### Summary of Use during Lactation

Similar to other aminoglycoside antibiotics, streptomycin is poorly excreted into breastmilk. Newborn infants apparently absorb small amounts of aminoglycosides, but serum levels are far below those attained when treating newborn infections and systemic effects of streptomycin are unlikely. Older infants would be expected to absorb even less streptomycin Monitor the infant for possible effects on the gastrointestinal flora, such as diarrhea, candidiasis (e.g., thrush, diaper rash) or rarely, blood in the stool indicating possible antibiotic-associated colitis.

### Drug Levels

Maternal Levels. Forty-six mothers receiving intramuscular streptomycin 250,000 MU had milk streptomycin levels measured hourly after a dose. The peak concentration in milk averaged 0.64 MU and occurred 9 hours after the dose. Mothers with unilateral mastitis had higher levels in the breast with mastitis than in the unaffected breast.[1] Although it is not clear what the above dose was in milligrams in this older Russian paper, if the same proportion is used, a 1 g intramuscular dose would result in a peak streptomycin milk level of 2.6 mg/L.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

One observational study found no inhibition of lactation by streptomycin.[1]

### References

1 Rudneva NN. (1967). Akush Ginekol (Mosk).

## Substance Identification

### Substance Name

Streptomycin

### CAS Registry Number

57-92-1

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Antibacterial Agents

Aminoglycosides

Antitubercular Agents